# Rosuvastatin

CASRN: 287714-41-4

## Drug Levels and Effects

### Summary of Use during Lactation

Levels of rosuvastatin in milk are low, and one case of an older infant breastfed during maternal rosuvastatin therapy found no adverse effects. The consensus opinion is that women taking a statin should not breastfeed because of a concern with disruption of infant lipid metabolism. However, others have argued that children homozygous for familial hypercholesterolemia are treated with statins beginning at 1 year of age, that statins have low oral bioavailability, and risks to the breastfed infant are low, especially with rosuvastatin and pravastatin.[1] Until more data become available, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. A woman with familial hypercholesterolemia was started on rosuvastatin 40 mg daily on day 33 postpartum. On one unspecified day after beginning rosuvastatin, the breastmilk rosuvastatin concentration was about 22 mcg/L at 21 hours after the previous dose. One hour after the dose, the breastmilk concentration was 15.2 mcg/L, and 7 hours after the dose, the breastmilk concentration was 29.4 mcg/L. Breastmilk concentrations were also measured on day 4 at 3 hours after the dose, day 24 at 3.8 hours after the dose, and on day 80 at 21 hours after the dose. All of these concentrations were in the range of 21 to 22 mcg/L.[2]

Rosuvastatin was being initiated in a nursing mother who was 13 months postpartum and weaning her infant. She began with a dose of 20 mg daily at bedtime. After 5 days of therapy, she donated 8 milk samples over a 24-hour period. The trough milk concentration was 16.6 mcg/L at 5 hours after the dose and remained relatively constant until about 15 hours after the dose. The peak milk concentration of 58.6 mcg/L occurred 17 hours after the dose. The authors calculated a daily infant dosage of 4.63 mcg/kg, which corresponded to a weight-adjusted 1.5% of the maternal dose.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A mother with familial hypercholesterolemia hypothyroidism stopped treatment of hyperlipidemia before pregnancy and lactation. At 13 months postpartum she began rosuvastatin 10 mg daily. At the time, the infant was receiving solid foods with 3 to 4 daytime breastfeeds and 2 to 3 nighttime breastfeeds. Lipid parameters in the infant were obtained at baseline and 1 and 5 months after the start of rosuvastatin. All lipid parameters (total cholesterol, triglycerides, HDL and LDL) remained in the normal range over the 5 months. All developmental parameters were normal except for weight at the 97^th^ percentile at 18 months.[4]

### Effects on Lactation and Breastmilk

A possible case of rosuvastatin-induced gynecomastia has been reported. Serum prolactin was not measured.[5]

### Alternate Drugs to Consider

Cholestyramine, Colesevelam, Colestipol

### References

1 Holmsen ST, Bakkebo T, Seferowicz M, et al. Statins and breastfeeding in familial hypercholesterolaemia. Tidsskr Nor Laegeforen 2017;137:686–7.28551957
2 Schutte AE, Symington EA, du Preez, JL. Rosuvastatin is transferred into human breast milk: A case report. Am J Med 2013;126:e7–8.23968910
3 Lwin EMP, Leggett C, Ritchie U, et al. Transfer of rosuvastatin into breast milk: Liquid chromatography-mass spectrometry methodology and clinical recommendations. Drug Des Devel Ther 2018;12:3645–51.30464396
4 Karatekin Ş, Şenol E. Neurodevelopmental and growth follow-up of an infant exposed to rosuvastatin by lactation: A case report. Breastfeed Med 2025;20:453–5.39866136
5 Oteri A, Catania MA, Travaglini R, et al. Gynecomastia possibly induced by rosuvastatin. Pharmacotherapy 2008;28:549–51.18363539

## Substance Identification

### Substance Name

Rosuvastatin

### CAS Registry Number

287714-41-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticholesteremic Agents

Hypolipidemic Agents

Hydroxymethylglutaryl-CoA Reductase Inhibitors